# Methocarbamol

CASRN: 532-03-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of methocarbamol during breastfeeding. If a mother requires methocarbamol, it is not a reason to discontinue breastfeeding. Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Methocarbamol

### CAS Registry Number

532-03-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Muscle Relaxants, Central